# Mitapivat

CASRN: 1260075-17-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mitapivat during breastfeeding. Because mitapivat is more than 97% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires mitapivat, it is not a reason to discontinue breastfeeding. Until more data are available, mitapivat should only be used with careful infant monitoring for jaundice during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mitapivat

### CAS Registry Number

1260075-17-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Activators